# Sodium Tetradecyl Sulfate

CASRN: 1191-50-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of sodium tetradecyl sulfate during breastfeeding. Although sodium tetradecyl sulfate is unlikely to adversely affect the breastfed infant, international guidelines recommend that breastfeeding be withheld for 2 days after sclerotherapy.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Wong M, Parsi K, Myers K, et al. (2023). Sclerotherapy of lower limb veins: Indications, contraindications and treatment strategies to prevent complications - A consensus document of the International Union of Phlebology-2023. Phlebology.

## Substance Identification

### Substance Name

### CAS Registry Number

1191-50-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Sclerosing Solutions

Sclerotherapies

Surface-Active Agents